# Fitusiran

CASRN: 1499251-18-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of fitusiran during breastfeeding. Because fitusiran is a large oligonucleotide, the amount in milk is likely to be very low and absorption by the infant is probably minimal. If fitusiran is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, use fitusiran with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Fitusiran

### CAS Registry Number

1499251-18-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Acetylgalactosamine

RNA, Small Interfering